# Dactinomycin

CASRN: 50-76-0

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of dactinomycin during breastfeeding. Most sources consider breastfeeding to be contraindicated during maternal antineoplastic drug therapy. The manufacturer recommends that breastfeeding be discontinued during dactinomycin therapy and for 14 days after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Dactinomycin

### CAS Registry Number

50-76-0

### Drug Class

- Breast Feeding
- Lactation
- Antineoplastic Agents
- Antibiotics, Antineoplastic
- Protein Synthesis Inhibitors
- Nucleic Acid Synthesis Inhibitors